# Echothiophate

CASRN: 513-10-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of echothiophate ophthalmic drops during breastfeeding. Because echothiophate is a quaternary ammonium compound, it is not likely to pass into the breastmilk or reach the bloodstream of the infant.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information in nursing mothers was not found as of the revision date. In animals, cholinergic drugs increase oxytocin release, and have variable effects on serum prolactin.[2,3] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### References

1 Johnson SM, Martínez M, Freedman S. (2001). Management of glaucoma in pregnancy and lactation. Surv Ophthalmol.
2 Clarke G, Fall CH, Lincoln DW, et al. (1978). Effects of cholinoceptor antagonists on the suckling-induced and experimentally evoked release of oxytocin. Br J Pharmacol.
3 Müller EE, Locatelli V, Cella S, et al. (1983). Prolactin-lowering and -releasing drugs: Mechanisms of action and therapeutic applications. Drugs.

## Substance Identification

### Substance Name

Echothiophate

### CAS Registry Number

513-10-0

### Drug Class

Breast Feeding

Lactation

Cholinesterase Inhibitors

Miotics

Parasympathomimetics